# Vonoprazan

CASRN: 881681-00-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of vonoprazan in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. Concentrations of vonoprazan were measured in breastmilk from 15 healthy lactating women following administration of vonoprazan 20 mg once daily (n = 5) or twice daily (n = 10) for 4 days. With the 20 mg vonoprazan once daily regimen, an average peak milk concentration of 20.9 mcg/L occurred at 1.9 hours after the dose and the average concentration of vonoprazan in breastmilk was 7.55 mcg/L. The estimated mean daily infant dose was 0.4 mg/kg, representing 0.128% of the maternal weight-adjusted dose or RID. With the 20 mg twice daily dosage regimen, an average peak milk concentration of 24.7 mcg/L occurred at 1.9 hours after the dose and the average concentration of vonoprazan in breastmilk was 13.3 mcg/L. The estimated average total amount of vonoprazan present in breastmilk over 24 hours was 9 mcg. The estimated mean daily infant dose was 1.5 mcg/kg, representing 0.269% of the maternal weight-adjusted dosage or RID.[1,2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with peripartum cardiomyopathy and severe nonsustained ventricular tachycardia gave birth to twins. Vonoprazan 10 mg daily as well as amiodarone, bisoprolol, edoxaban, febuxostat, imidapril, and pitavastatin were started postpartum. Breastfeeding began 39 days after birth when the daily intake of breastmilk was 160 mL for the first infant and 120 mL for the second, smaller infant. Breastmilk was mixed with infant formula and accounted for approximately one-quarter of their total daily milk intake. The mother breastfed in infants for approximately two months after starting breastfeeding and the infants had no bleeding tendency. At 3 years of age, both infants had a tendency toward obesity, but no other complications or developmental delay.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Omeprazole, Pantoprazole

### References

1 Phathom Pharmaceuticals Inc. A study to evaluate vonoprazan concentrations in breast milk of healthy lactating women receiving vonoprazan 20 mg once daily or vonoprazan 20 mg twice daily. clinicaltrials 2025https://clinicaltrials.gov/study/NCT06391177?intr=Vonoprazan&rank=3&tab=results
2 Mulford D, Brimhall D, Chang YM, et al. A Phase 1, open-label study to evaluate vonoprazan concentrations in breast milk of healthy lactating women receiving vonoprazan 20 mg once daily or vonoprazan 20 mg twice daily. Gastroenterology 2026;170 (6 Suppl):S2602–S3. doi:10.1016/S0016-5085(26)06160-3
3 Watanabe C, Wachi T, Kamada S, et al. Measurement of amiodarone levels in the breast milk of a Japanese woman with peripartum cardiomyopathy. Cureus 2025;17:e89301.40909045

## Substance Identification

### Substance Name

Vonoprazan

### CAS Registry Number

881681-00-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Ulcer Agents

Gastrointestinal Agents

Proton Pump Inhibitors